# Cyclosporine

CASRN: 59865-13-3

## Drug Levels and Effects

### Summary of Use during Lactation

Cyclosporine levels vary considerably in several case reports and series. This variability may be partially due to inconsistent sampling times among the reports and probably related to the fat content of the milk at the time of sampling. With typical maternal cyclosporine blood levels, a completely breastfed infant would usually receive no more than about 2% of the mother's weight-adjusted dosage or pediatric transplantation maintenance dosage, and often less than 1%. In most breastfed infants, cyclosporine is not detectable in blood; however, occasionally infants have had detectable blood levels, even when milk levels and infant dosage were low.

Numerous infants have been breastfed during maternal cyclosporine use, usually with a concurrent corticosteroid and sometimes with concurrent azathioprine. At least 2 mothers successfully breastfed a second infant after successfully breastfeeding the first infant. No reports of adverse effects on infants’ growth, development or kidney function have been reported, although thorough follow-up examinations have not always been performed or reported. Numerous experts and professional guidelines have stated that the drug is a low risk to nursing infants and acceptable to use during breastfeeding.[1-7] Breastfed infants should be monitored if this drug is used during lactation, possibly including measurement of serum levels to rule out toxicity if there is a concern.[8] Some, but not all, brands of cyclosporine contain small amounts of alcohol. Although some have warned against using cyclosporine for this reason, there is no evidence that the alcohol in cyclosporine is harmful to breastfed infants.

Because absorption from the eye is limited, ophthalmic cyclosporine would not be expected to cause any adverse effects in breastfed infants. To decrease the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. Early reports measured cyclosporine in breastmilk unsystematically. Cyclosporine levels of 101, 109 and 263 mcg/L were detected in random samples of breastmilk on days 2, 3 and 4 postpartum from a woman taking 450 mg daily orally. [9]

In one woman, a single milk concentration of 16 mcg/L was measured 22 hours after an oral dose of 325 mg given 2 hours before the onset of labor.[10] One mother's cyclosporine milk concentration averaged about 17% (range 12 to 22%) of simultaneous serum levels.[11]

In another mother, milk cyclosporine levels ranged from 15 to 90% higher than simultaneous serum levels. However, the authors estimated that a breastfed infant would receive less than 5% of an immunosuppressive dose.[12]

One breastfed infant was estimated to have a daily cyclosporine intake of 6 mcg/kg daily during maternal use of 225 mg daily of cyclosporine.[13]

A case series of 3 mothers found the following cyclosporine levels in colostrum. The first mother received 200 mg every 12 hours and had a colostrum level of 418 mcg/L 12 hours her last predelivery dose. The second mother was taking 150 mg every 12 hours and had a mean of 99 mcg/L (range 36 to 209 mcg/L) in 5 colostrum samples taken 3 to 5 days after delivery; The third mother was taking a dose of 125 mg every 12 hours and had levels of 45 to 83 mcg/L in 7 colostrum samples taken during the first 4 days postpartum; milk levels were 105 to 203 mcg/L in samples taken during days 6 to 10 postpartum.[14]

A mother taking 3 mg/kg twice daily with a blood trough cyclosporine blood level of 260 mcg/L had average milk levels of 596 mcg/L 5 weeks postpartum with milk levels varying with the time after the dose. The authors estimated that a fully breastfed infant would receive less than 0.1 mg/kg daily or less than 1.7% of the maternal weight-adjusted dosage.[15]

Five mothers taking cyclosporine in unspecified dosages had random milk levels ranging from 50 to 227 mcg/L in the immediate postpartum period. Two of these women collected several milk samples over the course of a day. A mother with a trough cyclosporine blood level of 62 mcg/L had milk levels ranging from 25 to 120 mcg/L. The other mother with a trough blood level of 110 mcg/L had milk levels ranging from 87 to 440 mcg/L. The authors estimated that a fully breastfed infant would receive less than 300 mcg of cyclosporine daily.[16]

One mother taking cyclosporine 300 mg twice daily had serum levels of 123 to 273 mcg/L and milk levels ranging from 79 to 286 mcg/L on 3 occasions over a 10-week period.[17]

Variable milk levels of cyclosporine were noted in a case series of 5 mother-infant pairs. Individual average milk cyclosporine levels varied from 98 to 118 mcg/L (range 45 to 203 mcg/L) in 3 of the mothers. A fourth mother taking a dose of 5.3 mg/kg daily of Neoral had mean foremilk levels of 465 mcg/L and hindmilk levels of 564 mcg/L (minimum foremilk 158 mcg/L, maximum hindmilk 1016 mcg/L). Estimated intake for the 5 infants averaged 0.86% (range from 0.2 to 2.1%) of the maternal weight-adjusted dosage. In 3 of the infants, calculated intake averaged 0.05 mg/kg (range 0.01 to 0.08 mg/kg) daily or about 1% of the pediatric maintenance dosage.[18]

A woman was taking oral cyclosporine 100 mg in the morning and 75 mg in the evening (2.1 mg/kg daily) during pregnancy and lactation. She was also taking azathioprine 75 mg and prednisone 10 mg daily. A milk sample was obtained 2 hours after the mother's morning dose. The breastmilk cyclosporine concentration was 46 mcg/L.[19]

A woman was taking cyclosporine for severe psoriasis during late pregnancy and while nursing. While taking a dose of 200 mg daily (apparently 100 mg twice daily), she collected milk samples 2 hours after her morning dose on 3 occasions. Milk cyclosporine levels were 128 mcg/L on day 10, 200 mcg/L on day 30, and 364 mcg/L on day 50. On day 40, the milk cyclosporine concentration before her morning dose was 207 mcg/L.[20]

A woman was receiving cyclosporine 1.5 mg/kg daily and everolimus 2 mg/kg daily during pregnancy and postpartum following a heart transplant. A colostrum sample was obtained one day postpartum which contained a cyclosporine level of 15.5 mcg/L. The timing of the sample with respect to the previous cyclosporine dose was not stated.[21]

A woman with nephrotic syndrome took cyclosporine, prednisone, and hydroxychloroquine during pregnancy and lactation. While taking cyclosporine 125 mg in the morning and 100 mg at night (total of 3 mg/kg daily), hindmilk samples were collected every 2 to 4 hours while awake for 48 hours starting on the 9th day postpartum. The 14 milk cyclosporine concentrations ranged from 0.443 to 5.3 mcg/L.[22]

Infant Levels. In 7 mothers who breastfed their infants during cyclosporine use (dosages not stated), infant serum cyclosporine levels were undetectable (<30 mcg/L).[16]

Another exclusively breastfed infant reportedly had undetectable serum cyclosporine levels (<25 mcg/L) with a maternal dose of 300 mg twice daily of the microemulsion.[17]

A partially breastfed infant whose mother was taking 125 mg twice daily had cyclosporine blood levels of 18 to 21 mcg/L during the first 21 days of life.[14]

Another mother taking cyclosporine 3 mg/kg twice daily exclusively breastfed her daughter who had undetectable (<3 mcg/L) cyclosporine blood levels.[10]

Among 4 infants in whom blood levels were measured, 3 had undetectable levels, but the fourth had "therapeutic" blood levels of 117 and 131 mcg/L on 2 occasions even though the infant's estimated dosage was only 1.1% of maternal weight-adjusted dosage.[18]

A 6-day-old infant who was about 50% breastfed had an undetectable (<10 mcg/L) cyclosporine whole blood concentration. The infant's mother was taking oral cyclosporine 100 mg in the morning and 75 mg in the evening (2.1 mg/kg daily) during pregnancy and lactation. The authors estimated that the cyclosporine dose this infant would receive if it were fully breastfed was 0.007 mg/kg or 0.33% of the weight-adjusted maternal dose.[19]

Two cases were reported of infants whose mothers were taking cyclosporine and breastfeeding. One mother was taking cyclosporine 200 mg daily as well as azathioprine, prednisone, diltiazem and folate. She exclusively breastfed her infant and at 1 week postpartum the infant's serum had undetectable (<15 mcg/L) cyclosporine levels while the mother's serum contained 68 mcg/L. The second mother was taking cyclosporine 120 mg daily as well as methyldopa, prednisone, and calcitriol. She exclusively breastfed her infant and at 2 weeks postpartum the infant's serum had undetectable (<15 mcg/L) cyclosporine levels while the mother's serum contained 39 mcg/L.[23]

A woman with severe ulcerative colitis during pregnancy received cyclosporine 5 mg/kg daily from 26 weeks of pregnancy and continued while breastfeeding. She extensive breastfed her infant and the infant's serum cyclosporine concentrations after the morning feed were consistently undetectable (<30 mcg/L).[24]

An infant whose mother took cyclosporine 200 mg daily for severe psoriasis during late pregnancy and while nursing. The infant was exclusively breastfed for 6 months. The infant's cyclosporine blood levels were 30 mcg/L on day 10 at 2 hours after the maternal dose, and undetectable (<25 mcg/L) on days 30, 40 and 50. The authors hypothesized that the level reported on day 10 derived from cyclosporine in the infant's adipose tissue, received during pregnancy.[20]

Seven post-transplant patients taking cyclosporine who did not breastfeed their infants expressed colostrum samples 4 times on day 2 or 3 postpartum before and up to 8 hours after their dose of cyclosporine. Mothers took dosages (usually 200 mg daily, divided into 2 doses) adjusted to a trough serum concentration between 120 and 150 mcg/L. The average cyclosporine concentration in colostrum was 22.4 mcg/L. The average infant dosage was estimated to be 1.05 mcg/kg daily, based on the volume of formula given to each infant. This dose is about 1000 times lower than the average maintenance dosage. In addition to cyclosporine, 3 metabolites were detected in colostrum with the following average values: a monohydroxylated metabolite (AM1) at 10.8 mcg/L, a dehydroxylated metabolite (DHCsA) at 54.6 mcg/L, and a trihydroxylated metabolite (THCsA) at 19.8 mcg/L. Other metabolites, including another monohydroxylated metabolite (AM9), a demethylated metabolite (AM4N), and demethylated-carboxylated metabolite (demCsA) were detected only in trace concentrations.[25]

### Effects in Breastfed Infants

One infant was breastfed and follow-up showed that the infant remained healthy and normal.[13]

A mother who was taking cyclosporine 3 mg/kg twice daily completely breastfed her infant until weaning with partial breastfeeding until 14 months. The infant's kidney function was stable, and she was healthy at 2 years of age. This mother also breastfed a second infant.[15]

In 7 infants breastfed for 4 to 12 months during maternal cyclosporine and prednisolone (plus azathioprine in 6 of the 7), infant renal function was unaffected, and they grew normally.[16]

One mother partially breastfed her infant during cyclosporine, azathioprine and prednisone use. No follow-up data were reported.[14]

One infant was exclusively breastfed for 10.5 months during maternal use of cyclosporine 300 mg twice daily, azathioprine and prednisone. Partial breastfeeding continued for 2 years. The infant thrived with normal growth at 12 months. The mother also breastfed a second child while on the same drug regimen.[17]

Four infants breastfed during maternal cyclosporine use. In three, no adverse effects were noted clinically on follow-up and one of these had normal serum creatinine and urea nitrogen (BUN) measured. No follow-up was reported on the fourth infant.[18]

Two cases were reported of infants whose mothers were taking cyclosporine and breastfeeding. One mother was taking cyclosporine 200 mg daily as well as azathioprine, prednisone, diltiazem, and folate. The second mother was taking cyclosporine 120 mg daily as well as methyldopa, prednisone, and calcitriol. Both mothers exclusively breastfed their infants initially and continued for 5 and 14 months, respectively. The infants were reportedly healthy and had normal renal function.[23]

A woman with severe ulcerative colitis during pregnancy received cyclosporine 5 mg/kg daily from 26 weeks of pregnancy and continued while breastfeeding. She extensive breastfed her infant and at 3 months of age the infant was healthy.[24]

The National Transplantation Pregnancy Registry reported data gathered from 1991 to 2011 on mothers who breastfed their infants following organ transplantation. A total of 43 mothers with transplants (mostly kidney) used cyclosporine while breastfeeding a total of 49 infants. Duration of nursing ranged from 1 week to 2 years and follow-up of the children ranged from weeks to 16 years. One infant experienced mildly elevated platelet count and an abnormal albumin/globulin ratio for age; at 16 months, laboratory values were normal. There were no reports of problems in the remainder of the infants or children.[26] A review of the Transplant Pregnancy Registry International database from 1999 to 2024 found that 66 mothers with transplants had breastfed their infants for at least 4 weeks while taking cyclosporine.[27]

A woman took cyclosporine 200 mg daily for psoriasis while exclusively breastfeeding her infant for 6 months. At 12 months of age, the infant was developing normally and had no discernible adverse effects from the drug in milk.[20]

A woman with nephrotic syndrome took cyclosporine, prednisone, and hydroxychloroquine during pregnancy and lactation. While breastfeeding she took cyclosporine 125 mg in the morning and 100 mg at night (total of 3 mg/kg daily), hydroxychloroquine 200 mg daily and prednisone 30 mg daily. Her twin infants began partially breastfeeding (70 to 80% breastmilk) on day 7 postpartum and she continued to breastfeed for several months. The infants gained weight normally at one month of age and had no adverse reactions in the first three months postpartum.[22]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Transplantation) Azathioprine, Tacrolimus; (Psoriasis) Adalimumab, Certolizumab Pegol, Etanercept, Infliximab, Phototherapy, Tretinoin; (Rheumatoid Arthritis) Adalimumab, Certolizumab Pegol, Infliximab, Tocilizumab

### References

1 Mahadevan U, Robinson C, Bernasko N, et al. Inflammatory bowel disease in pregnancy clinical care pathway: A report from the American Gastroenterological Association IBD Parenthood Project Working Group. Gastroenterology 2019;156:1508–24.30658060
2 Sammaritano LR, Bermas BL, Chakravarty EE, et al. 2020 American College of Rheumatology Guideline for the Management of Reproductive Health in Rheumatic and Musculoskeletal Diseases. Arthritis Rheumatol 2020;72:529–56.32090480
3 Yeung J, Gooderham MJ, Grewal P, et al. Management of plaque psoriasis with biologic therapies in women of child-bearing potential consensus paper. J Cutan Med Surg 2020;24 (1_Suppl):3S–14S.32500730
4 Russell MD, Dey M, Flint J, et al. British Society for Rheumatology guideline on prescribing drugs in pregnancy and breastfeeding: Immunomodulatory anti-rheumatic drugs and corticosteroids. Rheumatology (Oxford) 2023;62:e48–e88.36318966
5 Torres J, Chaparro M, Julsgaard M, et al. European Crohn's and Colitis Guidelines on Sexuality, Fertility, Pregnancy, and Lactation. J Crohns Colitis 2023;17:1–27.36005814
6 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025;84:910–26.40287311
7 Deleuran M, Dézfoulian B, Elberling J, et al. Systemic anti-inflammatory treatment of atopic dermatitis during conception, pregnancy and breastfeeding: Interdisciplinary expert consensus in Northern Europe. J Eur Acad Dermatol Venereol 2024;38:31–41.37818828
8 Laube R, Selinger CP, Seow CH, et al. Australian inflammatory bowel disease consensus statements for preconception, pregnancy and breast feeding. Gut 2023;72:1040–53.36944479
9 Lewis GJ, Lamont CA, Lee HA, et al. Successful pregnancy in a renal transplant recipient taking cyclosporin A. Br Med J 1983;286:603.6402165
10 Flechner SM, Katz AR, Rogers AJ, et al. The presence of cyclosporine in body tissues and fluids during pregnancy. Am J Kidney Dis 1985;5:60–3.3155592
11 Ziegenhagen DJ, Crombach G, Dieckmann M, et al. Pregnancy during cyclosporin medication following a kidney transplant. Dtsch Med Wochenschr 1988;113:260–3.3277831
12 Behrens O, Kohlhaw K, Gunter H, et al. Detection of cyclosporin A in breast milk--is breast feeding contraindicated? Geburtshilfe Frauenheilkd 1989;49:207–9.2649410
13 Moretti ME, Ito S, Koren G. Therapeutic drug monitoring in the lactating patient. Reprod Toxicol 1995;9:580–1. doi:10.1016/0890-6238(96)81372-4
14 Madill JE, Levy G, Greig P. Pregnancy and breast-feeding while receiving cyclosporine A. In: Williams B, Sandiford-Guttenbeil D, eds. Trends in organ transplantation. New York: Springer Publishing Company; 1996:109–21.
15 Thiru Y, Bateman DN, Coulthard MG. Successful breast feeding while mother was taking cyclosporin. BMJ 1997;315:463.9284666
16 Nyberg G, Haljamae U, Frisenette-Fich C, et al. Breast-feeding during treatment with cyclosporine. Transplantation 1998;65:253–5.9458024
17 Muñoz-Flores-Thiagarajan KD, Easterling T, Davis C, et al. Breast-feeding by a cyclosporine-treated mother. Obstet Gynecol 2001;97:816–8.11336764
18 Moretti ME, Sgro M, Johnson DW, et al. Cyclosporine excretion into breast milk. Transplantation 2003;75:2144–6.12829927
19 Osadchy A, Koren G. Cyclosporine and lactation: when the mother is willing to breastfeed. Ther Drug Monit 2011;33:147–8.21240055
20 Mazzuoccolo LD, Andrada R, Pellerano G, et al. Levels of cyclosporine in breast milk and passage into the circulation of the infant of a mother with psoriasis. Int J Dermatol 2014;53:355–6.23336105
21 Fiocchi R, D'Elia E, Vittori C, et al. First report of a successful pregnancy in an everolimus-treated heart-transplanted patient: Neonatal disappearance of immunosuppressive drugs. Am J Transplant 2016;16:1319–22.26555407
22 Li R, Zhang C, Wang H, et al. Breastfeeding by a mother taking cyclosporine for nephrotic syndrome. Int Breastfeed J 2022;17:72.36253832
23 Morton A. Cyclosporine and lactation. Nephrology (Carlton) 2011;16:249.21272141
24 Lahiff C, Moss AC. Cyclosporine in the management of severe ulcerative colitis while breast-feeding. Inflamm Bowel Dis 2011;17:E78.21538721
25 Kociszewska-Najman B, Mazanowska N, Borek-Dzięcioł B, et al. Low content of cyclosporine A and its metabolites in the colostrum of post-transplant mothers. Nutrients 2020;12:2713.32899873
26 Thiagarajan KM, Arakali SR, Mealey KJ, et al. Safety considerations: Breastfeeding after transplant. Prog Transplant 2013;23:137–46.23782661
27 Coscia LA, Kliniewski D, Rao S, et al. Breastfeeding after transplantation: 25 year review (1999-2024). Am J Transplant 2025;25:S772. doi:10.1016/j.ajt.2025.07.1820

## Substance Identification

### Substance Name

Cyclosporine

### CAS Registry Number

59865-13-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antirheumatic Agents

Calcineurin Inhibitors

Immunosuppressive Agents